# Temazepam

CASRN: 846-50-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of temazepam in breastmilk and its relatively short half-life, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. Taking the bedtime dose after the infant's last feeding of the day may minimize the dose received by an older infant who is sleeping through the night. Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. A woman who had been abusing benzodiazepines was taking diazepam 80 mg of diazepam as well as oxazepam. Temazepam is a metabolite of diazepam. Milk samples were taken before and after the morning feeding following the morning dose of diazepam during a 30-day tapering dosage regimen. The average of the pre- and post-feed temazepam milk levels were 13 and 18 mcg/L on days 14 and 15 during maternal intake of diazepam 40 mg daily. The average of the pre- and post-feed temazepam milk levels were 13 and 14 mcg/L on days 23 and 25 during maternal intake of diazepam 30 mg daily.[1]

Ten women who were less than 15 days postpartum were given temazepam 10 or 20 mg (0.16 to 0.32 mg/kg) at bedtime once daily for at least 2 days prior to being studied. Milk samples were taken immediately before and after a feeding that ranged from 10.3 to 21.3 hours after the dose. Milk temazepam levels were undetectable (<5 mcg/L) in 9 of the 10 women. In the tenth who had a plasma temazepam of 234 mcg/L (several times higher than the other women), milk temazepam levels were 28 and 26 mcg/L before and after a feed that occurred 14.1 hours after the previous dose of temazepam. Oxazepam, a metabolite of temazepam, was undetectable (<5 mcg/L) in all of the subjects' milk samples.[2]

Infant Levels. Two breastfed infants had undetectable (<5 mcg/L) plasma levels of temazepam or its metabolite oxazepam 13.3 and 14.8 hours after maternal doses of temazepam 0.16 and 0.17 mg/kg orally.[2]

### Effects in Breastfed Infants

Ten infants who were less than 15 days old were breastfed by mothers who had taken temazepam 10 or 20 mg (0.16 to 0.32 mg/kg) at bedtime once daily for at least 2 days. None of the infants had any observable adverse reactions.[2]

In a telephone follow-up study, 124 mothers who took a benzodiazepine while nursing reported whether their infants had any signs of sedation. One mother took temazepam while breastfeeding and reported no sedation in her infant.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Dusci LJ, Good SM, Hall RW, et al. Excretion of diazepam and its metabolites in human milk during withdrawal from combination high dose diazepam and oxazepam. Br J Clin Pharmacol 1990;29:123-6.2105100
2 Lebedevs TH, Wojnar-Horton RE, Yapp P, et al. Excretion of temazepam in breast milk. Br J Clin Pharmacol 1992;33:204-6.1550703
3 Kelly LE, Poon S, Madadi P, et al. Neonatal benzodiazepines exposure during breastfeeding. J Pediatr 2012;161:448-51.22504099

## Substance Identification

### Substance Name

Temazepam

### CAS Registry Number

846-50-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines